# Oxycodone

CASRN: 76-42-6

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Sedation and apnea have occurred in breastfed infants after maternal use of oxycodone. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If oxycodone is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to treat pain with a nonnarcotic analgesic and limit maternal intake of oral oxycodone (and combinations) to 30 mg daily for 2 to 3 days, especially in the outpatient setting.[1-3] Monitor the infant closely for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Extended-release oxycodone products (such as OxyContin) are not recommended in nursing mothers.

### Drug Levels

Oxycodone is metabolized to the active metabolites, noroxycodone and oxymorphone. Oxycodone has an oral bioavailability of 60% to 87% in adults. Oxycodone elimination is decreased in young infants, and much inter-individual variability exists.

Maternal Levels. Six breastfeeding mothers who were using 1 to 2 capsules containing a combination of 5 mg oxycodone and 500 mg acetaminophen every 4 to 7 hours for post-cesarean section pain had their milk sampled several times after successive doses. Peak oxycodone milk levels reportedly occurred 1 to 2 hours after the first dose and then at variable times after successive doses. The number of hours after a mother's last dose when oxycodone could still be measured in milk was depended on the number of doses taken. Oxycodone could be measured in milk up to 4, 12, and 36 hours after 4, 9, and 11 doses, respectively. In all the mothers, measured oxycodone milk levels ranged from undetectable (<5 mcg/L) to 229 mcg/L. The authors estimated that an exclusively breastfed infant would receive a maximum 8% of the maternal weight-adjusted dosage of oxycodone, but active metabolite levels were not measured.[4]

Fifty mothers who delivered by cesarean section and received oxycodone had milk (colostrum) and serum samples measured for oxycodone at 24, 48 and 72 hours postpartum without respect to the time of the previous oxycodone dose. The most common doses received by the mothers during the previous 24 hours (including one 30 mg dose rectally immediately postoperatively in some cases) were 60 mg (range 30 to 90 mg), 40 mg (range 0 to 90 mg), and 20 mg (range 0 to 50 mg), respectively. Mean colostrum concentrations at the 3 collection times were 58 mcg/L (range 7 to 130 mcg/L), 49 mcg/L (range 0 to 168 mcg/L), and 35 mcg/L (range 0 to 31 mcg/L), respectively. Little correlation was found between maternal dosage and colostrum concentration although colostrum levels correlated well with maternal serum levels, with colostrum concentrations 3.2 to 3.4 higher than serum. Ten mothers had colostrum oxycodone concentrations over 100 mcg/L and 5 had detectable oxycodone in milk 37 hours after the last dose.[5]

Forty-three women who had given birth via cesarean section were given oxycodone 10 mg every 12 hours either as controlled-release tablets either with naloxone 5 mg (Targiniq) or without naloxone (Oxycontin). In addition, women as needed oxycodone 5 or 10 mg subcutaneously, sublingually or PO, or 3 mg intravenously during the study period. In addition, participants received 25 to 50 mg of dexketoprofen three times a day and 1000 mg of acetaminophen four times a day, the first doses intravenously and subsequent doses orally. Milk samples were obtained before the first dose on the evening of the procedure and each morning until postoperative day (POD) 3, although 11 of the women were unable to produce any samples. The concentrations of oxycodone and noroxycodone were analyzed in milk. The median total oxycodone consumption from operation day to POD3 was 83 mg (range 35 to 171 mg) in the oxycodone-naloxone group and 77 mg (range 30 to153 mg) in the oxycodone group. Mothers also received median doses of 19.5 to 20 mg of rescue oxycodone on the day of the operation, 5 to 7.5 mg on POD 1, and none on PODs 2 and 3, although some women did receive doses up to 30 mg on POD 2 and 5 mg on POD 3. Oxymorphone and noroxymorphone were not measured in milk, but were measured in maternal plasma. Noroxycodone and noroxymorphone levels were found in higher concentrations in maternal plasma and noroxycodone levels were higher in milk than oxycodone. Simulations of infant doses of oxycodone intake indicated that with the maximum oxycodone milk concentration and a large milk intake, that an RID of 9% could be reached, but with typical milk intake, RID would be <1% However, the simulations did not take into account noroxycodone, oxymorphone or noroxymorphone, so firm conclusions are hard to reach.[6]

A study of 76 mothers taking a median oxycodone dosage of 33.0 mg daily (range 5.4 to 59.3 mg daily) measured oxycodone, noroxycodone, and oxymorphone in 101 breastmilk samples taken at 3-hour intervals after a dose. The highest average oxycodone milk concentrations was 10.6 mcg/L at 0 to 3 hours after a 5 mg dose and 19.5 mcg/L at 0 to 3 hours after a 10 mg dose. The highest average oxymorphone milk concentrations were 27.9 mcg/L at 3 to 6 hours after a 5 mg dose and 60.5 mcg/L after a 10 mg dose of oxycodone. The highest average noroxycodone milk concentration was 39.1 mcg/L at 3 to 6 hours after a 5 or 10 mg dose of oxycodone. Using the average concentrations of oxycodone, noroxycodone and oxymorphone in milk and assuming equal potency, the infant would receive an estimated 2.8% of an infant dosage of oxycodone in 24 hours with the median 33 mg daily maternal dosage.[7]

Infant Levels. In a study of 50 mothers taking oxycodone post-cesarean section, 45 blood samples were taken from 41 breastfed infants at 24, 48 or 72 hours postpartum. Only 1 of the samples had a detectable (>2 mcg/L) oxycodone level of 7.4 mcg/L. Because these infants were in the first 3 days postpartum, their dosage was probably limited by the small volumes of colostrum they were ingesting.[5]

A woman who was exclusively breastfeeding her infant was taking 5 to 10 mg of oxycodone every 4 to 6 hours for episiotomy pain. Her 45-day-old infant's urine drug screen showed a concentration of >2000 mcg/L (positive cutoff for opioid metabolites was 5 mcg/L).[8]

A study of 76 mothers taking a median oxycodone dose of 33.0 mg daily (range 5.4 to 59.3 mg daily) measured oxycodone, noroxycodone, and oxymorphone in the plasma of 25 of their breastfed infants. At 3 to 6 hours after breastfeeding, the plasma concentration of oxycodone was 0.2 to 0.4 mcg/L in 6 infants and noroxycodone concentrations was 0.2 to 0.3 mcg/L in 10 infants. The other infants had no quantifiable amounts (<0.1 mcg/L) of the drugs. Oxymorphone was undetectable (<0.1 mcg/L) in all infant plasma samples at any time period. Because these infants were in the first 3 days postpartum, their dosage was probably limited by the small volumes of colostrum they were ingesting.[7]

### Effects in Breastfed Infants

A 10-month-old, 7.7 kg infant of a prescription drug-dependent mother died of cardiac arrest after a 12- to 24-hour period of lethargy, hypersomnolence and dyspnea. The infant also had a recent history of fever. The mother had reportedly been breastfeeding the infant 3 times a day for several weeks and had taken 180 mg of oxycodone, as well as muscle relaxants, the day prior to her infant's death. A blood oxycodone level of 600 mcg/L was measured on autopsy. The medical examiner considered it unlikely that such a high level of oxycodone in the infant's blood could be due to breastfeeding exposure as reported by the mother and thus considered the death a homicide resulting from either the intentional administration of oxycodone directly to the infant or from a higher dose of oxycodone in breastmilk than that reported by the mother.[9]

In a study of 50 mothers taking oxycodone post-cesarean section, 50 neonates were evaluated for sedation over 48 hours after birth. None was severely sedated and less than 4% had sedation of 3 on a 1 (fully alert) to 5 (difficult to rouse) scale and none more sedated than 3 on the scale. Because these infants were in the first 3 days postpartum, their oxycodone dose was probably limited by the small volumes of colostrum they were ingesting.[5]

An infant was born to a mother taking oxycodone 20 mg 3 times daily, fluoxetine 40 mg daily and quetiapine 400 mg daily. The infant was breastfed 6 to 7 times daily and received 120 mcg of oral morphine 3 times daily for opiate withdrawal. Upon examination at 3 months of age, the infant's weight was at the 25th percentile for age, having been at the 50th percentile at birth. The authors attributed the weight loss to opiate withdrawal. The infant's Denver developmental score was equal to his chronological age.[10]

A woman who was exclusively breastfeeding her infant was taking 5 to 10 mg of oxycodone every 4 to 6 hours for episiotomy pain. Her 45-day-old infant was brought to the emergency department with a temperature of 98.4 degrees F, a heart rate of 154 per minute, 20 breaths per minute, a blood pressure of 71/52, and an oxygen saturation of 60% to 69% on room air. The infant had been constipated since birth, passing one stool every 5 to 8 days. The infant had sluggish movements slow, shallow, and irregular breathing. Her pupils were small, but reactive. Hydromorphone levels in urine were elevated. The patient was intubated and given opiates around the clock for two days before being extubated and discharged. The infant's constipation, CNS and respiratory depression were probably caused by oxycodone in breastmilk.[8]

In a retrospective study, nursing mothers who were taking either oxycodone, codeine or acetaminophen for pain while breastfeeding were contacted by telephone to ascertain the degree of maternally perceived central nervous system (CNS) depression. Mothers taking oxycodone reported signs of CNS depression in 20% (28/139) of their infants, while those taking acetaminophen reported infant CNS depression in only 0.5% (1/184) of their infants. Women who reported infant sedation were taking 0.4 mg/kg daily of oxycodone, and unaffected were taking 0.15 mg/kg daily. Affected infants had more hours of daily uninterrupted sleep than unaffected infants, and 4 of the affected infants reportedly had "irregular breathing". Thirty-eight of 39 mothers reported that infant sedation ceased with maternal oxycodone discontinuation. Mothers of affected infants were also more likely to experience lethargy and other side effects than mothers of unaffected infants. Mothers who took codeine reported a similar rate of infant sedation (17%) compared to oxycodone, but the groups were statistically different in parity and postmenstrual age (PMA), with the codeine group having a slightly higher PMA.[11]

A newborn infant was exclusively breastfed and found to be well by his physician at 2 days of age. At 3 days postpartum, the infant began to be sedated and became difficult to arouse and did not feed from either breast. At 4 days of age, the infant was brought to the emergency department where the infant was found to have lethargy, hypothermia, pinpoint pupils, and a poor sucking reflex. The mother reported that her milk had come in the previous evening. She had taken 10 mg of oxycodone that evening and another 5 mg the next morning in the form of Percocet (oxycodone 5 mg plus acetaminophen 325 mg). The infant was given naloxone 0.34 mg intramuscularly and within 2 minutes, the baby's eyes opened, and he drank 45 mL of formula. No further sedation was seen over the next 24 hours.[12] The infant's sedation was probably caused by oxycodone in breastmilk.

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 7 were classified as resulting in a major adverse effect, and 3 of these involved oxycodone. A 16-day-old infant was exposed to cyclobenzaprine, acetaminophen and oxycodone in breastmilk. The infant was admitted to the hospital in a noncritical care unit for bradycardia, hypotension, and respiratory arrest. A 14-day-old infant was exposed to acetaminophen and oxycodone and developed cyanosis. The infant was treated and released. A one-month-old infant was exposed to fentanyl, morphine, oxycodone, and benzodiazepines. The infant was admitted to the intensive care unit and described as being agitated and irritable and having tachycardia, confusion, drowsiness, lethargy, miosis, respiratory depression, acidosis, and hyperglycemia. The dosages and extent of breastfeeding were not reported in any of the cases and the infants all survived.[13]

A cross-sectional survey of mothers who had breastfed their infants in the past 12 months identified 142 mothers who had taken one or more medications while nursing. One of the mothers who was taking a combination product with oxycodone and naloxone reported that her infant developed drowsiness or sleepiness, which caused her to stop the drug.[14]

In population study in the province of Ontario, Canada, 85,852 who filled an opioid prescription within seven days of discharge after delivery were matched to 538,815 did not. Compared with infants born to mothers who were not prescribed an opioid, those born to mothers prescribed an opioid were no more likely to be admitted to hospital in the 30 days after the index date. Infants born to mothers prescribed opioids after delivery were slightly more likely to be taken to the emergency department in the subsequent 30 days (hazard ratio 1.04). Forty-two percent of the mothers prescribed an opioid were prescribed oxycodone. No infant deaths occurred. Of note is that the median drug supply was for 3 days (IQR 2-4).[15]

A study of 76 mothers were taking a median oxycodone dosage of 33.0 mg daily (range 5.4 to 59.3 mg daily). Mild to moderate respiratory depression was observed in 10 infants and mild hypotension was observed in 3 infants. None of these events were attributed to oxycodone by the investigators. The risk of adverse events was probably minimized by the small amount of colostrum being ingested by the 1 to 3 day-old infants.[7]

A prospective observational study of 210 breastfeeding women post-cesarean section and their infants compared women taking oxycodone (77%) to those who did not. The study further classified the women according to their CYP2D6 status. Among neonates, 28 (13%) experienced at least one opioid-related adverse outcome, including monitoring of respiratory depression (n = 8), sedation (n = 7), and limpness (n = 15) over PPD 0–3. In addition, 37% (n = 77) neonates had extended length of stay longer than 72 hours and three neonates (1%) exhibited opioid withdrawal symptoms during hospital stays. The risk of an adverse reaction increased with an increase in total oxycodone dosage that the mothers took during hospitalization, relative risks of 1.8 for dosages up to 70 mg and 3.8 for dosages over 70 mg (p=0.07). There was a possible increased risk in infants whose mothers were ultrarapid CYP2D6 metabolizers, but the number of women in this category was too small to make a definitive conclusion.[16]

An infant born at 37 weeks and 4 days was admitted to the NICU because of respiratory distress, later determined to be secondary to transient tachypnea of the newborn. While in the NICU, he was on gavage feeds of formula and maternal breastmilk every three hours. After his respiratory distress resolved, he was transitioned to only maternal breastmilk every three hours. The mother had been prescribed 60 mg of oxycodone daily on postpartum day two. She provided breastmilk to the infant via direct nursing or expressed milk. On day of life three, the neonate experienced an episode of bradycardia and desaturation while stooling, which recurred the following morning along with an associated apneic event with desaturation. Maternal breastmilk was held, and donor milk and formula were initiated. The mother was instructed to discard expressed milk until her oxycodone dose decreased to 40 mg daily. She chose to discontinue oxycodone and delay breastfeeding until 48 hours after her last dose. No further apneic events occurred following the transition to donor milk and formula. The neonate was discharged home on day seven postpartum, weighing 3.41 kg, on a formula diet. The neonate appeared well at his well-child check on day eight postpartum. Earlier that morning, his mother had reintroduced breastmilk into his diet, as it had been 48 hours since her last dose of oxycodone. He tolerated the maternal breastmilk well and had no recurrent episodes of respiratory distress. Review of systems and physical examination were negative for any concerning findings. The patient appeared to be growing and developing appropriately without signs of illness.[17] Oxycodone was possibly the cause of the infant’s apneic events.

### Effects on Lactation and Breastmilk

Oxycodone can increase serum prolactin.[18] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Ito S. Opioids in breast milk: Pharmacokinetic principles and clinical implications. J Clin Pharmacol 2018;58 (Suppl 10):S151–S63.30248201
2 McKenzie C, Straube L, Webster C, et al. A quality improvement effort to reduce inpatient opioid consumption following cesarean delivery. Am J Perinatol 2024;41:e406–e11.35750319
3 Peahl AF, Hallway A, Kenney B, et al. Pain and recovery following cesarean delivery in patients receiving an opioid-sparing pain regimen. AJOG Global Reports 2023;3:100248.37645651
4 Marx CM, Pucino F, Carlson JD, et al. Oxycodone excretion in human milk in the puerperium. Drug Intell Clin Pharm 1986;20:474.
5 Seaton S, Reeves M, McLean S. Oxycodone as a component of multimodal analgesia for lactating mothers after Caesarean section: Relationships between maternal plasma, breast milk and neonatal plasma levels. Aust N Z J Obstet Gynaecol 2007;47:181–5.17550483
6 Pesonen A, Hakomäki H, Kokki H, et al. Breast milk oxycodone concentrations in mothers given oxycodone for post-Caesarean delivery pain management. Br J Clin Pharmacol 2024;90:1183–92.38308454
7 Zimmerman K. Pharmacokinetics and safety of commonly used drugs in lactating women and breastfed infants - oxycodone (version 1) [dataset]. NICHD Data and Specimen Hub 2023doi:10.57982/0k9e-ef77
8 Sulton-Villavasso C, Austin CA, Patra KP, et al. Index of suspicion. Case 1: Infant who has respiratory distress. Case 2: Abnormal behavior, seizures, and altered sensorium in a 7-year-old boy. Case 3: Fever and dysphagia in a 4-year-old girl. Pediatr Rev 2012;33:279–84.22659261
9 Levine B, Moore KA, Aronica-Pollak P, et al. Oxycodone intoxication in an infant: Accidental or intentional exposure? J Forensic Sci 2004;49:1358–60.15568714
10 Rampono J, Kristensen JH, Ilett KF, et al. Quetiapine and breast feeding. Ann Pharmacother 2007;41:711–4.17374621
11 Lam J, Kelly L, Ciszkowski C, et al. Central nervous system depression of neonates breastfed by mothers receiving oxycodone for postpartum analgesia. J Pediatr 2012;160:33–7.21880331
12 Timm NL. Maternal use of oxycodone resulting in opioid intoxication in her breastfed neonate. J Pediatr 2013;162:421–2.23063265
13 Beauchamp GA, Hendrickson RG, Horowitz BZ, et al. Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508–12.31211594
14 Ahmadzai H, Tee LBG, Crowe A. Adverse drug reactions in breastfed infants: A cross-sectional study of lactating mothers. Breastfeed Med 2022;17:1011–17.36315169
15 Zipursky JS, Gomes T, Everett K, et al. Maternal opioid treatment after delivery and risk of adverse infant outcomes: Population based cohort study. Bmj 2023;380:e074005.36921977
16 Shah SS, Lin HS, Baheti S, et al. Safety and pharmacogenetics of oxycodone in post-cesarean analgesia and breastfeeding dyads: A proactive approach to precision medicine. Healthcare (Basel) 2025;14:93.41517024
17 Wallace ML, Himmelbaum R. Neonatal respiratory depression associated with maternal oxycodone use during breastfeeding. Cureus 2026;18:e105882.42037859
18 Saarialho-Kere U, Mattila MJ, Seppala T. Psychomotor, respiratory and neuroendocrinological effects of a mu-opioid receptor agonist (oxycodone) in healthy volunteers. Pharmacol Toxicol 1989;65:252–7.2555803

## Substance Identification

### Substance Name

Oxycodone

### CAS Registry Number

76-42-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Antitussive Agents

Opiates